# Prothionamide

CASRN: 14222-60-7

## Drug Levels and Effects

### Summary of Use during Lactation

Prothionamide (protionamide) is not approved for marketing in the United States by the U.S. Food and Drug Administration, but is available in other countries. No information is available on the use of prothionamide during breastfeeding. International sources consider breastfeeding to be acceptable during prothionamide use, but mothers should receive 100 mg of pyridoxine daily and the breastfed infant should receive pyridoxine 1 to 2 mg/kg once daily. Monitor the breastfed infant for gastrointestinal disturbances.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Anon. Ethionamide (Eto) or prothionamide (Pto). MSF Medical Guidelines 2026. https://medicalguidelines.msf.org/en/viewport/TUB/english/ethionamide-eto-or-prothionamide-pto-20324029.html#section-target-3

## Substance Identification

### Substance Name

Prothionamide

### CAS Registry Number

14222-60-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-infective Agents

Antitubercular Agents